# Etidronate

CASRN: 2809-21-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of etidronate during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. However, absorption of etidronate by a breastfed infant is unlikely.

### Drug Levels

Etidronate is poorly absorbed orally (average in adults 3% on an empty stomach, less with food), so absorption of etidronate by a breastfed infant is unlikely.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Pamidronate

## Substance Identification

### Substance Name

Etidronate

### CAS Registry Number

2809-21-4

### Drug Class

- Breast Feeding
- Lactation
- Bisphosphonates
- Bone Density Conservation Agents
- Diphosphonates